# Ombitasvir

CASRN: 1258226-87-7

## Drug Levels and Effects

### Summary of Use during Lactation

Ombitasvir is no longer marketed in the United State. It has not been studied in nursing mothers being treated for hepatitis C infection. Because it is 99.9% bound to maternal plasma proteins, amounts in breastmilk are likely to be very low.

Ritonavir used as a booster has been studied in several studies of breastfeeding mothers. It is excreted into milk in measurable concentrations and low levels can be found in the blood of some breastfed infants. No reports of adverse reactions in breastfed infants have been reported. For more information, refer to the LactMed record on ritonavir.

Hepatitis C is not transmitted through breastmilk and breastmilk has been shown to inactivate hepatitis C virus (HCV).[1–4] However, the Centers for Disease Control recommends that mothers with HCV infection should consider abstaining from breastfeeding if their nipples are cracked or bleeding. It is not clear if this warning would apply to mothers who are being treated for hepatitis C.

Infants born to mothers with HCV infection should be tested for HCV infection; because maternal antibody is present for the first 18 months of life and before the infant mounts an immunologic response, nucleic acid testing is recommended.[1,4]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Hepatitis C) Interferon Alfa, Interferon Alfacon-1, Peginterferon Alfa, Sofosbuvir

### References

1 Cottrell EB, Chou R, Wasson N, . Reducing risk for mother-to-infant transmission of hepatitis C virus: A systematic review for the U.S. Preventive Services Task Force. Ann Intern Med 2013;158:109–13.23437438
2 Pfaender S, Heyden J, Friesland M, . Inactivation of hepatitis C virus infectivity by human breast milk. J Infect Dis 2013;208:1943–52.24068703
3 Tovo PA, Calitri C, Scolfaro C, . Vertically acquired hepatitis C virus infection: Correlates of transmission and disease progression. World J Gastroenterol 2016;22:1382–92.26819507
4 Workowski KA, Bachmann LH, Chan PA, . Sexually transmitted infections treatment guidelines, 2021. MMWR Recomm Rep 2021;70:1–187.

## Substance Identification

### Substance Name

Ombitasvir

### CAS Registry Number

1258226-87-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antiviral Agents

NS5A Inhibitors